# Isoniazid

CASRN: 54-85-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of isoniazid in breastmilk and safe administration directly to infants, it is unlikely to cause adverse reactions in infants, but infants should be monitored for rare instances of jaundice. Giving the maternal once-daily dose before the infant's longest sleep period will decrease the dose the infant receives. The amount of isoniazid in milk is insufficient to treat tuberculosis in the breastfed infant. If breastfed infants are treated with isoniazid, they should also receive pyridoxine 1 mg/kg daily.[1] The Centers for Disease Control and Prevention and other professional organizations state that breastfeeding should not be discouraged in women taking isoniazid.[2]

All nursing mothers who are taking isoniazid should take 25 mg of oral pyridoxine daily.[2] A study of nursing African mothers with concurrent HIV and tuberculosis infections found that those receiving isoniazid had an increased risk of niacin deficiency (pellagra). The authors suggested that a multivitamin supplement might be advisable during isoniazid therapy in populations with undernutrition.[3]

### Drug Levels

Maternal Levels. Thirty mothers (time postpartum not stated) were given a single oral dose of 200 mg of isoniazid and a single milk sample was taken from each mother at various times between 2 and 7 hours after the dose. An average peak milk level of 2.1 mg/L (range 1.7 to 2.3 mg/L) occurred in 6 women at 2 hours after the dose. By 7 hours after the dose the average milk level was 0.46 mg/L (range 0.3 to 0.6 mg/L) in 3 women.[4]

Three mothers were given single oral isoniazid doses of 300 mg (5 mg/kg) and 600 mg (10 mg/kg). Peak isoniazid levels occurred 3 hours after the dose in all cases. Peak levels were 5.4 to 5.5 mg/L after 300 mg and 9 to 10.6 mg/L after 600 mg. At 12 hours after the dose, milk levels were undetectable (<0.25 mg/L) after the 300 mg dose and 0.25 to 0.5 mg/L after the 600 mg dose.[5]

A lactating mother (time postpartum not stated) was given a single oral 300 mg dose of isoniazid after weaning. Breastmilk was collected at various times during the next 24 hours. Peak milk levels of 16.6 mg/L of isoniazid occurred at 3 hours and 3.8 mg/L of acetylisoniazid occurred at 5 hours after the dose. Both were still detectable in milk at 24 hours. Half-lives in milk were 5.9 hours for isoniazid and 13.5 hours for acetylisoniazid. The authors estimated that a total of 7 mg would be excreted into milk in 24 hours.[6]

Seven women with an average weight of 40 kg had been receiving isoniazid 300 mg once daily for at least 34 days. All women were also receiving rifampin and ethambutol. Blood and milk samples were collected at 0, 1, 2, 3, and 4 hours after a dose for analysis of isoniazid; metabolites were not measured. Peak milk isoniazid concentrations of 2 to 6.7 mg/L occurred 1 hour after the dose and dropped by about half by 4 hours after the dose. The authors calculated that a fully breastfed infant would receive a dose of 89.9 mcg/kg daily compared to a recommended infant dosage of 10 mg/kg daily. This dose is equivalent to 1.2% of the maternal weight-adjusted dosage.[7]

A physiologically based pharmacokinetic model was developed for isoniazid. The model showed that mothers given 300 mg daily who were fast metabolizers of INH would have a breastmilk level of 5.2 mg/L and slow metabolizers would have breastmilk levels of 6.75 mg/L. These amounts would provide a dose of 0.58 mg daily to their infants if they were fast metabolizers and a dose of 1.49 mg daily to their infants if they were slow metabolizers. The model predicted that the weight-adjusted infant dosage would be 0.2% of maternal dosage in the milk of fast-metabolizer mothers and 0.5% of maternal dosage in the milk of slow-metabolizer mothers.[8]

Two breastfeeding women with tuberculosis were receiving ethambutol as well as at least 4 other antituberculars donated 1 mL breastmilk samples by manual expression at approximately 6 weeks postpartum. Samples were obtained immediately prior to a dose and 2, 4, and 6 hours after a dose of 900 mg of isoniazid. Peak milk isoniazid concentrations of 14 and 17.6 mg/L occurred at about 2 to 4 hours after a dose. The authors used the peak concentrations to calculate infant daily dosages of 2.1 and 2.64 mg/kg, which ranged from 14 to 26% of the infant dosage and 12.1 to 16.4% of the maternal weight-adjusted dosage. These values are overestimates because peak milk concentrations were used rather than average concentrations. In addition, acetylisoniazid was measured in peak milk concentrations of 4 to 8 mg/L.[9]

Infant Levels. Isoniazid was detectable in the urine of 2 of 3 breastfed infants whose mothers were given a single oral dose of 600 mg. The total amount excreted by the infants over 24 hours was about 6.8 to 7 mg.[5] Metabolites were not measured.

A physiologically based pharmacokinetic model was developed for isoniazid. The model showed that mothers given 300 mg daily would result in infant plasma levels of 0.07 mg/L if both mother and infant were fast metabolizers. If both were slow metabolizers, infant levels would be 0.25 mg/L. Infant serum levels would be intermediate if mothers and infants had opposite metabolizer status.[8]

### Effects in Breastfed Infants

In one uncontrolled study, 6-beta-hydroxycortisol levels were measured in 10 male infants whose mothers had tuberculosis and took ethambutol 1 gram daily plus isoniazid 300 mg daily and the infants of mothers (apparently without tuberculosis) who took no chronic drug therapy. The infants of mothers taking the antituberculars had consistently lower 6-beta-hydroxycortisol levels on 8 occasions at 15-day intervals from 90 to 195 days of age, but these differences were statistically significant on days 120 and 195 only. The authors attributed the lower levels to inhibition of hepatic metabolism of cortisol to 6-beta-hydroxycortisol by the antitubercular drugs in milk.[10] However, ethambutol is not known to inhibit drug metabolism, so if the effect occurs it is more likely caused by isoniazid.

One woman taking rifampin 450 mg, isoniazid 300 mg and ethambutol 1200 mg daily during pregnancy and rifampin 450 mg and isoniazid 300 mg for the first 7 months of lactation (extent not stated). The infant was born with mildly elevated serum liver enzymes which persisted for to 1 (alanine transferase) to 2 years (aspartate transaminase), but had no other adverse reactions.[11]

Isoniazid was used as part of multi-drug regimens to treat 2 pregnant women with multidrug-resistant tuberculosis during the second and third trimesters of pregnancy and postpartum. Their two infants were breastfed (extent and duration not stated). At age 3.9 and 4.6 years, the children were developing normally except for a mild speech delay in one.[12]

Two mothers in Türkiye were diagnosed with tuberculosis at the 30th and 34th weeks of pregnancy. They immediately started isoniazid 300 mg, rifampin 600 mg, pyridoxine 50 mg daily for 6 months, plus pyrazinamide 25 mg/kg and ethambutol 25 mg/kg daily for 2 months. Both mothers breastfed their infants (extent not stated). Their infants were given isoniazid 5 mg/kg daily for 3 months prophylactically. Tuberculin skin tests were negative after 3 months and neither infant had tuberculosis at 1 year of age. No adverse effects of the drugs were mentioned.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Di Comite A, Esposito S, Villani A, et al. How to manage neonatal tuberculosis. J Perinatol 2016;36:80-5.26270256
2 Nahid P, Dorman SE, Alipanah N, et al. Official American Thoracic Society/Centers for Disease Control and Prevention/Infectious Diseases Society of America Clinical Practice Guidelines: Treatment of Drug-Susceptible Tuberculosis. Clin Infect Dis 2016;63:e147-e95.27516382
3 Nabity SA, Mponda K, Gutreuter S, et al. Isoniazid-associated pellagra during mass scale-up of tuberculosis preventive therapy: A case-control study. Lancet Glob Health 2022;10:e705-e14.35427527
4 Lass A, Bünger P. [Studies on the diffusion of isoniazid in the fetal circulation, the amniotic fluid and human milk]. Klin Wochenschr 1953;31:606-8.13097858
5 Ricci G, Copaitich T. Modalità di eliminazione dell'isoniazide somministrata per via orale attraverso il latte di donna. Rass Clin Ter 1954;53:209-14.14372127
6 Berlin CM, Jr, Lee C. Isoniazid and acetylisoniazid disposition in human milk, saliva and plasma. Fed Proc 1979;38 (part 1):426.
7 Singh N, Golani A, Patel Z, et al. Transfer of isoniazid from circulation to breast milk in lactating women on chronic therapy for tuberculosis. Br J Clin Pharmacol 2008;65:418-22.18093257
8 Garessus EDG, Mielke H, Gundert-Remy U. Exposure of infants to isoniazid via breast milk after maternal drug intake of recommended doses is clinically insignificant irrespective of metaboliser status. A physiologically-based pharmacokinetic (PBPK) modelling approach to estimate drug exposure of infants via breast-feeding. Front Pharmacol 2019;10:5.30723406
9 Zuma P, Joubert A, van der Merwe M, et al. Validation and application of a quantitative LC-MS/MS assay for the analysis of first-line anti-tuberculosis drugs, rifabutin and their metabolites in human breast milk. J Chromatogr B Analyt Technol Biomed Life Sci 2022;1211:123489.36215877
10 Toddywalla VS, Patel SB, Betrabet SS, et al. Can chronic maternal drug therapy alter the nursing infant's hepatic drug metabolizing enzyme pattern? J Clin Pharmacol 1995;35:1025-9.8568011
11 Peters C, Nienhaus A. Fallbericht einer beruflich erworbenen tuberkulose in der schwangerschaft. Pneumologie 2008;62:695-8.18855309
12 Drobac PC, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92.15889370
13 Keskin N, Yilmaz S. Pregnancy and tuberculosis: To assess tuberculosis cases in pregnancy in a developing region retrospectively and two case reports. Arch Gynecol Obstet 2008;278:451-5.18273625

## Substance Identification

### Substance Name

Isoniazid

### CAS Registry Number

54-85-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antitubercular Agents